# Cannabidiol

CASRN: 13956-29-1

## Drug Levels and Effects

### Summary of Use during Lactation

Cannabidiol is a component of cannabis. Cannabidiol has not been studied in nursing women taking the pharmaceutical product (Epidiolex), but it has been detected in the breastmilk of some mothers who used cannabis products.[1-3] Because no published information is available with cannabidiol use as an antiepileptic during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs reported in LactMed.

Maternal Levels. Cannabidiol was measured in the milk of mothers who reported using cannabis and donated milk samples. Fifty mothers donated 54 samples of milk to a breastmilk repository. The median concentration of cannabidiol was 5 mcg/L (range 1.3 to 8.6 mcg/L).[2]

A physiologically based pharmacokinetic model of cannabidiol was constructed using data from 181 cannabis-using mothers who donated 200 samples of breastmilk to a breastmilk repository. Of these, 42% had cannabidiol concentration below the level of quantification. Maternal ingestion by oil or pipe tended to result in higher predicted concentrations as compared with joint, blunt or edible forms. The dose in infants was projected to result in exposure of fully breastfed infants of less than 1% of that in children 4 to 10 years old who were receiving the drug therapeutically for seizures.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Silveira GD, Loddi S, De Oliveira CDR, et al. Headspace solid-phase microextraction and gas chromatography-mass spectrometry for determination of cannabinoids in human breast milk. Forensic Toxicol 2017;35:125-32. doi:10.1007/s11419-016-0346-5
2 Bertrand KA, Hanan NJ, Honerkamp-Smith G, et al. Marijuana use by breastfeeding mothers and cannabinoid concentrations in breast milk. Pediatrics 2018;142:e20181076.30150212
3 Yeung CHT, Bertrand KA, Best BM, et al. Cannabidiol exposure through maternal marijuana use: Predictions in breastfed infants. Clin Pharmacokinet 2023;62:1611-9.37735347

## Substance Identification

### Substance Name

Cannabidiol

### CAS Registry Number

13956-29-1

### Drug Class

Breast feeding

Lactation

Milk, Human

Anticonvulsants

Cannabinoids